# Valproic Acid

CASRN: 99-66-1

## Drug Levels and Effects

### Summary of Use during Lactation

Valproic acid levels in breastmilk are low and infant serum levels range from undetectable to low. Breastfeeding during valproic acid monotherapy does not appear to adversely affect infant growth or development. Breastfed infants of mothers taking valproate had higher IQs and enhanced verbal abilities than nonbreastfed infants at 6 years of age in one study.[1] A safety scoring system finds valproic acid possible to use during breastfeeding,[2] and a computer model predicted a relatively low infant exposure, consistent with literature reports.[3] If valproic acid is required by the mother, it is not a reason to discontinue breastfeeding.

No definite adverse reactions to valproic acid in breastfed infants have been reported. Theoretically, breastfed infants are at risk for valproic acid-induced hepatotoxicity, and a questionable case of thrombocytopenia has been reported. A rare case of infant baldness might have been caused by valproate in milk. Monitor the infant for jaundice and unusual bruising or bleeding. Combination therapy with sedating anticonvulsants or psychotropics may result in infant sedation or withdrawal reactions.

### Drug Levels

In published reports of anticonvulsant use during breastfeeding, most women were taking a combination of anticonvulsants. Some other anticonvulsants (e.g., phenytoin, carbamazepine) stimulate the metabolism of other drugs including anticonvulsants, whereas others (e.g., valproic acid) inhibit the metabolism of other drugs. Therefore, the relationship of the maternal dosage to the concentration in breastmilk can be quite variable, making calculation of the weight-adjusted percentage of maternal dosage less meaningful than for other drugs in this database.

Maternal Levels. An epileptic mother was taking valproic acid 2.4 grams daily and primidone 250 mg 3 times daily during pregnancy and postpartum. During the second week postpartum, a breastmilk valproic acid level was 7 mg/L, which was 7% of her serum level.[4]

An epileptic mother was taking valproic acid 1.6 grams daily in divided doses. The breastmilk level at 5 days postpartum was 7.2 mg/L; by 29 days postpartum, it had fallen to 3 mg/L.[5]

A woman was taking valproic acid 250 mg twice daily during pregnancy and postpartum. At 62 hours postpartum she had a milk level of 0.18 mg/L which was 16 hours after her last dose. At 130 hours postpartum she had a milk level of 0.46 mg/L which was 3 hours after her last dose.[6]

A woman taking valproic acid 250 mg twice daily had milk valproate levels of 2 mg/L 30 minutes after taking a dose. The milk level fell to 0.43 mg/L 1 hour later and to undetectable levels (<0.4 mg/L) an hour after that.[7]

The valproic acid level in the breastmilk of mothers 5 mothers taking valproic acid ranged between 0.4 to 3.9 mg/L. The dosages they were receiving was not stated, but milk levels ranged between 1.3 and 7.1% of the maternal plasma level.[8] This case series was extended to 16 women taking an average of 22.1 mg/kg daily of valproic acid. They had average milk valproate levels of 1.8 mg/L.[9]

In 6 women taking valproic acid in dosages ranging from 9.6 to 31 mg/kg daily, milk valproate levels ranged from 0.034 to 5.4 mg/L and levels of the metabolite 3-keto-valproate ranged from 0.04 to 0.48 mg/L.[10] Extension of the study to 13 patients did not markedly alter the results.[11]

Four women taking valproic acid (1 took 1.2 grams daily and 3 took 1.5 grams daily) had breastmilk valproate levels measured. Specific milk concentrations are not given, but milk levels were 5 to 10% of maternal serum levels, consistent with other studies. The authors estimated that a breastfed infant would receive only 6 mg in a liter of milk.[12]

Four mothers taking valproic acid (3 took 1.2 grams daily and 1 took 1.8 grams daily) during pregnancy and postpartum had breastmilk levels measured during the first week postpartum. The average breastmilk levels were 1.8 mg/L (range 1 to 3.8 mg/L).[13]

One woman taking valproic acid 1 gram daily had milk levels of 3, 2.3 and 1.4 mg/L on postpartum days 6, 7, and 17, respectively. Another woman was taking valproic acid 1.4 gram plus carbamazepine 600 mg and diazepam 2 mg daily. Milk valproate levels were 2, 1.4, 3.5, 2.3 and 2.8 mg/L on postpartum days 1, 3, 15, 29, and 43, respectively.[14]

A case series of 30 patients taking valproic acid reported milk levels collected between day 6 and 32 postpartum (median 7 days), mostly in the morning before the first dose of the day. Seventeen were taking valproic acid monotherapy, with or without clonazepam, in a mean dosage of 11.3 mg/kg daily. Sixteen milk levels that were measured had a mean milk valproate level of 1.6 mg/L (range <1 to 13.3 mg/L). Three mothers were taking valproic acid plus the enzyme inhibitor lamotrigine in a mean dosage of 11.2 mg/kg daily. Two milk levels that were measured had milk valproate levels <1 mg/L. Nine were taking valproic acid plus an enzyme-inducing drug in a mean dosage of 14.6 mg/kg daily. Ten milk levels that were measured had a mean milk valproate level of 2.1 mg/L (range <1 to 16.7 mg/L). No correlation was observed between the maternal serum levels and milk levels measured at the same time.[15]

The same center reported colostrum valproate concentrations in 54 mothers taking valproic acid monotherapy. The median colostrum concentration was 0.5 mg/L, with a range of 0.5 to 5.9 mg/L. The mean colostrum concentration was 1.2 mg/L. Colostrum levels of valproate were similar in women taking other anticonvulsants, including those that are enzyme inducers.[16]

Infant Levels. The breastfed infant of an epileptic mother who was taking valproic acid 1.6 grams daily in divided doses had serum valproic acid level of about 7.5 mg/L on day 5 of life that fell to undetectable levels by day 29.[5]

A 2-month-old breastfed infant was nursed by a mother taking valproic acid 250 mg twice daily. Infant serum levels were undetectable (<0.3 mg/L) before nursing and reached a peak of 14 mg/L 30 minutes after nursing which was 2 hours after the mother's dose. The serum level fell to 7 mg/L 1.5 hours later.[7]

The infant of a mother who was taking valproic acid monotherapy 600 mg twice daily had a serum valproic acid level of 6.6 mg/L at 3 months of age.[17]

Two infants whose mothers were taking valproic acid monotherapy for bipolar disorder were studied. A 1-month-old infant had a serum valproate level of 4 mg/L during maternal therapy with 750 mg daily in divided doses. Another fully breastfed 3-month-old whose mother was taking 250 mg of valproic acid twice daily had a serum level of 1 mg/L.[18]

Two breastfed infants whose mothers were taking valproic acid 500 mg daily for bipolar disorder had undetectable (<3.5 and <5 mcg/L) serum valproate levels. Both mothers were also taking clonazepam; one was also taking trifluoperazine and the other was taking fluoxetine.[19]

Four exclusively breastfed infants whose mothers began taking valproic acid monotherapy postpartum in dosages of 750 or 1000 mg daily had average serum levels of 1 mg/L which averaged 1.8% of their mothers' serum levels. Another infant that was 80% breastfed during maternal treatment with 1 gram daily had a serum level of 0.7 mg/L or 1% of the maternal serum level. A sixth infant that was 50% breastfed during maternal treatment with 1 gram daily had a serum level of 0.7 mg/L or 1.2% of the maternal serum level. All infant serum levels were taken between 4 and 19 weeks of age.[20]

A case series of 30 women taking valproic acid had their infants' serum valproate levels measured between day 6 and 32 postpartum (median 7 days), mostly in the morning before the first dose of the day. The extent and timing of breastfeeding were not reported. Seventeen mothers were taking valproic acid monotherapy, with or without clonazepam, in a mean dosage of 11.3 mg/kg daily. Eighteen infant serum levels that were measured had a mean of 3.7 mg/L (range <1 to 11.6 mg/L), with a mean ratio of maternal to infant serum level of 0.1. Three mothers were taking valproic acid plus the enzyme inhibitor lamotrigine in a mean dosage of 11.2 mg/kg daily. Four infant serum levels that were measured had a mean of 4.5 mg/L (range <1 to 6.6 mg/L), with a mean ratio of maternal to infant serum level of 0.12. Nine mothers were taking valproic acid plus an enzyme-inducing drug in a mean dosage of 14.6 mg/kg daily. Eleven infant serum levels that were measured had a mean valproate level of 5.1 mg/L (range <1 to 17.5 mg/L), with a mean ratio of maternal to infant serum level of 0.14. No correlation was observed between the maternal serum levels and infant serum levels measured at the same time.[15]

In a multicenter study of nursing mother-infant pairs, 2 infants had blood samples taken at about the same time as maternal blood samples. Neither of the infants had blood levels of valproic acid above the lower limit of quantification (15 mg/L). The authors estimated the average infant valproic acid serum concentration to be 7.5 mg/L, assuming unquantifiable serum concentrations to be 50% of the lower limit of quantification. Median infant blood levels were 17.2% (range 12.4 to 22%) of their mothers’ blood levels.[21]

Serum samples were obtained from infants whose mothers were taking valproic acid between the 2nd and 5th days (median 3 days) postpartum, usually before the morning maternal dose. The median infant serum level was 15.5 mg/L with a range of 0.5 to 42.9 mg/L. The mean serum concentration was 15.9 mg/L. In 17 of the infants with later levels, serum concentration dropped precipitously between the initial levels and levels obtained between days 6 and 29 postpartum.[16]

### Effects in Breastfed Infants

A mother with epilepsy was taking valproic acid 2.4 grams daily and primidone 250 mg 3 times daily during pregnancy and postpartum. During the second week postpartum, her breastfed infant was sedated. Breastfeeding was stopped and the drowsiness cleared.[4] The sedation was possibly caused by primidone in breastmilk although valproic acid might have contributed by increasing primidone levels.

Petechiae, thrombocytopenia, anemia, and mild hematuria occurred in a 2.5-month-old breastfed infant whose mother was taking valproic acid 600 mg twice daily. Blood hemoglobin and reticulocytes normalized between 12 and 19 days after discontinuing breastfeeding. The petechiae resolved 35 days after discontinuing breastfeeding and the infant's platelet count had almost reached the normal range by this time. By day 83, the infant's platelet count was well within the normal range. The authors believed the adverse effect to be caused by valproic acid in breastmilk.[17] However, other authors believe that these symptoms were more likely caused by idiopathic thrombocytopenic purpura following a viral infection.[20]

Two breastfed infants aged 1 and 3 months whose mothers were taking valproic acid monotherapy 750 and 500 mg daily developed normally and had no abnormal laboratory values. Their plasma levels were 6% and 1.5% or their mother's serum levels, respectively.[18]

Six breastfed infants whose mothers were taking valproic acid 750 or 1000 mg daily had no adverse reactions to valproic acid in breastmilk.[20]

An exclusively breastfed infants whose mother was taking valproate 1.8 g, topiramate 300 mg, and levetiracetam 2 g, daily during pregnancy and lactation appeared healthy to the investigators throughout the 6- to 8-week study period.[22]

In a long-term study on infants exposed to anticonvulsants during breastfeeding, no difference in average intelligence quotient at 3 years of age was found between infants who were breastfed (n = 11) a median of 6 months and those not breastfed (n = 24) when their mothers were taking valproate monotherapy.[23] At 6 years of age, extensive psychological and intelligence testing found that the breastfed infants had statistically significantly higher IQ values (106 vs 94), than the nonbreastfed infants.[1]

A prospective cohort study in Norway followed infants of mothers who took antiepileptic drugs during pregnancy and lactation and compared them to infants of mothers with untreated epilepsy and infants with fathers who took antiepileptics as control groups. Of the 223 mothers studied, 27 were taking valproate monotherapy. Infants were assessed at 6, 18 and 36 months of age. Continuous breastfeeding in children of women using antiepileptic drugs was associated with no greater impaired development than those with no breastfeeding or breastfeeding for less than 6 months.[24,25]

A woman with bipolar disorder who delivered twins and was taking sodium valproate in a therapeutic dosage was started on quetiapine 200 mg and olanzapine 15 mg at 11 pm daily after 20 days postpartum. She withheld breastfeeding during the night and discarded milk pumped at 7 am. She then breastfed her infants until 11 pm. The mother continued feeding the infants on this schedule for 15 months. Monthly follow-up of the infants indicated normal growth and neither the pediatricians nor the parents noted any adverse effects in the infants.[26]

The 4-month-old breastfed infant of a mother taking divalproex for bipolar disorder developed patchy hair loss. The extent of nursing and dosage of divalproex were not stated. Divalproex was discontinued and 2 months later, the infant’s hair was normal.[27] The hair loss was possibly caused by valproate.

A review of 10 years of reports to the European adverse drug reaction database EudraVigilance found 7 unspecified serious adverse reactions reported in breastfed infants associated with valproic acid. Further details of the cases were not reported.[28]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

(Bipolar Disorder) Divalproex, Lithium, Olanzapine, Quetiapine, Risperidone; (Migraine Prophylaxis) Divalproex, Erenumab, Metoprolol, Nortriptyline, Propranolol, Rimegepant, Topiramate; (Seizure Disorder) Carbamazepine, Divalproex, Gabapentin, Lamotrigine, Oxcarbazepine, Phenytoin, Valproic Acid

### References

1 Meador KJ, Baker GA, Browning N, et al. Breastfeeding in children of women taking antiepileptic drugs: Cognitive outcomes at age 6 years. JAMA Pediatr 2014;168:729–36.24934501
2 Uguz F. A new safety scoring system for the use of psychotropic drugs during lactation. Am J Ther 2021;28:e118–e26.30601177
3 Nauwelaerts N, Bouillon T, Deferm N, et al. Physiologically based pharmacokinetic (PBPK) modelling to predict breast milk exposure of valproic acid. FASEB J 2022;36 (S1). doi:10.1096/fasebj.2022.36.S1.R2039
4 Espir ML, Benton P, Will E, et al. Sodium valproate (Epilim) - some clinical and pharmacological aspects. In: Legg N, ed. Clinical and pharmacological aspects of sodium valproate in the treatment of epilepsy: Proceedings of a symposium. Turnbridge Wells, England: MCS Consultants; 1976:145–51.
5 Alexander FW. Sodium valproate and pregnancy. Arch Dis Child 1979;54:240.373647
6 Dickinson RG, Harland RC, Lynn RK, et al. Transmission of valproic acid (Depakene) across the placenta: Half-life of the drug in mother and baby. J Pediatr 1979;94:832–5.376803
7 Bardy AH, Granstrom ML, Hiilesmaa VK. Valproic acid and breast-feeding. In: Janz D, Bossi L, Dam M, Helge H, Richens A, Schmidt D, eds. Epilepsy, pregnancy and the child. New York: Raven Press; 1982:359–60.
8 Froescher W, Eichelbaum M, Niesen M, et al. Antiepileptic therapy with carbamazepine and valproic acid during pregnancy and lactation period. In: Dam M, ed. Advances in epileptology: XIIth epilepsy international symposium. New York: Raven Press; 1981:581–8.
9 von Unruh GE, Froescher W, Hoffmann F, et al. Valproic acid in breast milk: How much is really there? Ther Drug Monit 1984;6:272–6.6438834
10 Nau H, Rating D, Koch S, et al. Valproic acid and its metabolites: Placental transfer, neonatal pharmacokinetics, transfer via mother's milk and clinical status in neonates of epileptic mothers. J Pharmacol Exp Ther 1981;219:768–77.6795343
11 Nau H, Helge H, Luck W. Valproic acid in the perinatal period: Decreased maternal serum protein binding results in fetal accumulation and neonatal displacement of the drug and metabolites. J Pediatr 1984;104:627–34.6423793
12 Philbert A, Pedersen B, Dam M. Concentration of valproate during pregnancy, in the newborn and in breast milk. Acta Neurol Scand 1985;72:460–3.3936331
13 Meyer FP, Quednow B, Potrafki A, et al. The perinatal pharmacokinetics of anticonvulsant drugs. Zentralbl Gynakol 1988;110:1195–205.3239295
14 Tsuru N, Maeda T, Tsuruoka M. Three cases of delivery under sodium valproate-placental transfer, milk transfer and probable teratogenicity of sodium valproate. Jpn J Psychiatry Neurol 1988;42:89–96.3135429
15 Kacirova I, Grundmann M, Brozmanova H. Valproic acid concentrations in nursing mothers, mature milk, and breastfed infants in monotherapy and combination therapy. Epilepsy Behav 2019;95:112–6.31035102
16 Kacirova I, Grundmann M, Brozmanova H. Valproic acid concentrations in mothers, colostrum and breastfed infants during the early postpartum period: Comparison with concentrations determined during delivery and in the mature milk period. Pharmaceutics 2021;13:2074.34959355
17 Stahl MM, Neiderud J, Vinge E. Thrombocytopenic purpura and anemia in a breast-fed infant whose mother was treated with valproic acid. J Pediatr 1997;130:1001–3.9202628
18 Wisner KL, Perel JM. Serum levels of valproate and carbamazepine in breastfeeding mother-infant pairs. J Clin Psychopharmacol 1998;18:167–9.9555601
19 Birnbaum CS, Cohen LS, Bailey JW, et al. Serum concentrations of antidepressants and benzodiazepines in nursing infants: A case series. Pediatrics 1999;104:e11.10390297
20 Piontek CM, Baab S, Peindl KS, et al. Serum valproate levels in 6 breastfeeding mother-infant pairs. J Clin Psychiatry 2000;61:170–2.10817100
21 Birnbaum AK, Meador KJ, Karanam A, et al. Antiepileptic drug exposure in infants of breastfeeding mothers with epilepsy. JAMA Neurol 2020;77:441–50.31886825
22 Johannessen SI, Helde G, Brodtkorb E. Levetiracetam concentrations in serum and in breast milk at birth and during lactation. Epilepsia 2005;46:775–7.15857447
23 Meador KJ, Baker GA, Browning N, et al. Effects of breastfeeding in children of women taking antiepileptic drugs. Neurology 2010;75:1954–60.21106960
24 Veiby G, Engelsen BA, Gilhus NE. Early child development and exposure to antiepileptic drugs prenatally and through breastfeeding: A prospective cohort study on children of women with epilepsy. JAMA Neurol 2013;70:1367–74.24061295
25 Vajda F. Epilepsy: Effects of exposure to antiepileptic drugs during development. Nat Rev Neurol 2014;10:11–2.24323050
26 Aydin B, Nayir T, Sahin S, et al. Olanzapine and quetiapine use during breastfeeding: Excretion into breast milk and safe breastfeeding strategy. J Clin Psychopharmacol 2015;35:206–8.25679127
27 Govindan K, Mandadi GD. Alopecia in breastfed infant possibly due to mother getting valproate. Indian J Pediatr 2021;88:519–20.32557138
28 Heerfordt IM, Gotfredsen DR, Horwitz H, et al. EudraVigilance insights: Suspected adverse drug reactions in infants through breastfeeding. Br J Clin Pharmacol 2025;91:2431–6.40190021

## Substance Identification

### Substance Name

Valproic Acid

### CAS Registry Number

99-66-1

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anticonvulsants

Antimanic Agents

GABA Agents